# Morphine

CASRN: 57-27-2

SID: 134970862

## Drug Levels and Effects

### Summary of Use during Lactation

Epidural morphine given to mothers for postcesarean section analgesia results in trivial amounts of morphine in their colostrum and milk. Intravenous or oral doses of maternal morphine in the immediate postpartum period result in higher milk levels than with epidural morphine. Labor pain medication may delay the onset of lactation. Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression, although low-dose morphine might be preferred over other opiates.[1,2] Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. Extended-release morphine products (such as MSContin) are not recommended in nursing mothers. If morphine is required by the mother of a newborn, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of morphine to 2 to 3 days at a low dosage with close infant monitoring, especially in the outpatient setting.[3] If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness during maternal morphine use, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

Some evidence suggests that IV ketorolac, oral ibuprofen and acetaminophen as part of a multimodal post-cesarean section analgesia reduces percentage of mothers who fail exclusive breastfeeding compared to patient-controlled IV morphine-based analgesia.[4]

### Drug Levels

Morphine is metabolized to inactive morphine-3-glucuronide (60%) and to active morphine-6-glucuronide (10%). Morphine has an oral bioavailability of about 30% in adults. Morphine-6-glucuronide has an oral bioavailability of about 4% but can probably be converted back to morphine in the infant's gut and absorbed as morphine. The plasma clearance of morphine is prolonged in very young infants compared to older infants and children. Usual therapeutic intravenous doses of morphine in infants are 10 mcg/kg/hour or 50 to 100 mcg/kg as a single dose. Usual single oral doses of morphine in infants are 100 to 500 mcg/kg.

Maternal Levels. Five lactating mothers who were at least 1 month postpartum were given 1 to 2 doses of either epidural 4 mg or parenteral (intravenous or intramuscular) 5 to 15 mg morphine every 4 to 6 hours for postoperative analgesia. Milk samples were taken from each mother 10 times over the 8 hours after her dose. The peak milk level after epidural morphine was 82 mcg/L and occurred 30 minutes after a second dose. The peak milk level after parenteral morphine was about 500 mcg/L and occurred about 45 minutes after a single 15 mg (10 mg intravenous plus 5 mg intramuscular) dose. The half-life in milk was about 3 hours.[5] Using the peak milk levels from this study, an exclusively breastfed infant would receive 75 mcg/kg daily.

Six women who received epidural morphine 5 mg for labor analgesia had their initial colostrum sampled postpartum (range 24-100 hours after epidural). Morphine was undetectable (<0.6 mcg/L) in 4 of the women. The peak morphine level was 4.5 mcg/L and was measured 28 hours after the epidural dose.[6] Considering the small amount of colostrum consumed by the infant, based on the peak level in this study, an exclusively breastfed infant would only receive a negligible amount of morphine from a maternal epidural 5 mg morphine dose for labor analgesia.

Five mothers who had undergone cesarean section delivery at term were given intravenous morphine 7.5 mg after umbilical cord clamping and then 1 to 1.5 mg every 6 minutes via intravenous patient-controlled analgesia (PCA) as needed for up to 48 hours postpartum. When PCA morphine was discontinued, oral morphine 5-30 mg every 2 to 3 hours as needed was given. Colostrum and milk were sampled from each of the mothers 6 times over 96 hours postpartum. Average milk levels from all the mothers studied were about 50 to 65 mcg/L in the first 48 hours postpartum and then dropped to about 20 mcg/L by 72 to 96 hours postpartum. The average cumulative intravenous only dose in the first 48 hours postpartum was about 150 mg. The average cumulative intravenous plus oral morphine dose over the entire 96 hours was about 250 mg.[7] Using the average milk levels reported at each of the 6 collection times from this study, an exclusively breastfed infant would receive about 5 mcg/kg daily. Using the maximum level of 65 mcg/L reported in the first 48 hours postpartum when mothers were receiving intravenous morphine, and assuming 30% oral absorption by the infant, an exclusively breastfed infant would absorb a maximum of about 3 mcg/kg daily equal to 0.3% of the intravenous maternal weight-adjusted daily dosage.

One mother who was 21 days postpartum received oral morphine 10 mg every 6 hours for 4 doses then 5 mg every 6 hours for 2 doses. She had a peak morphine breastmilk level of 100 mcg/L at 1 hour after breastfeeding and 4.5 hours after her first 5 mg dose.[8] Using the peak milk level from this study, an exclusively breastfed infant would receive 15 mcg/kg daily, equal to about 3% of the maternal daily dosage, assuming a daily maternal oral morphine dose of 40 mg.

Epidural morphine 5 mg was given to 30 women immediately following cesarean section and again 24 hours later. There were measurable colostrum morphine levels 12 to 36 hours after delivery in only 3 of the women (range 0.39 to 0.66 mcg/L). The remaining 27 women had undetectable (<0.12 mcg/L) morphine milk levels.[9]

One breastfeeding woman receiving 4 to 8 mg daily of continuous intrathecal morphine had her milk sampled 11 times over 7 weeks postpartum. Levels in milk were undetectable (<8 mcg/L) in 8 of the 11 samples. In 3 of the 11 samples, morphine was detected, but only at levels below the quantification sensitivity of the assay (8 to 25 mcg/L) and was not related to maternal dose.[10] Using the maximum possible milk level of 25 mcg/L from this study, an exclusively breastfed infant would receive about 3 mcg/kg daily from this maternal intrathecal morphine dose regimen.

Seven women who had preterm infants delivered by cesarean section were started on intravenous morphine 7 to 10 mg over 30 to 60 minutes, then 1 mg every 10 minutes by patient-controlled analgesia (PCA) as needed, for up to 48 hours postpartum. Colostrum samples were taken just prior to PCA initiation and again at 12, 24, 36, and 48 hours postpartum. The average cumulative morphine dose was about 60 mg in 48 hours. Three of the women could not produce enough milk for sampling. Morphine and its active 6-glucuronide metabolite were detectable in 3 of the remaining 4 women. There was high intersubject variability with peak milk levels occurring at different times and a wide range of levels measured in each of the women. The peak milk morphine level was 48 mcg/L, and the peak 6-glucuronide metabolite level was 1,084 mcg/L. The authors reported median morphine levels of 34, 24, 7, 6.5 and 21 mcg/L and 6-glucuronide levels of 273, 672, 426, 527 and 350 mcg/L at 0, 12, 24, 36 and 48 hours, respectively.[11] Using the reported median milk levels from the 60 mg cumulative 48 hour maternal morphine dose in this study, an exclusively breastfed infant would receive 2.4 mcg/kg daily of morphine and 73 mcg/kg daily of the 6-glucuronide metabolite. Using the peak milk level data from this study, an exclusively breastfed infant would receive an estimated maximum of 7.2 mcg/kg daily of morphine and 163 mcg/kg daily of the 6-glucuronide metabolite.

Twelve women who underwent cesarean section deliveries at 37 to 41 weeks of gestation received a single dose of 2 mg of morphine epidurally. Colostrum was collected several times during the first 24 hours postpartum. The highest average morphine concentration was reported to be 6.2 mg/L and occurred in colostrum 3.2 hours after the cesarean section. The morphine concentration fell with an average half-life of 2.9 hours. By 6 hours after the dose, the reported concentration was 1.1 mg/L. By 24 hours, the drug was undetectable in colostrum.[12] Note: it is likely that this paper reported the milk concentration values in the wrong units. The values reported were probably in mcg/L, not mg/L.

Infant Levels. In a term infant, the measured plasma morphine level was 1.2 mcg/L. The measurement was taken 108 hours after the mother's last dose of morphine and no morphine was detected in her milk. The mother's dose was not reported.[13]

One mother of a term 21-day-old breastfeeding infant received a 10-day tapering dose of oral morphine beginning with 50 mg every 6 hours. On day 9 she received 10 mg every 6 hours, then 5 mg every 6 hours on day 10. The infant's serum morphine level was 4 mcg/L measured 1 hour after breastfeeding and 4 hours after the first 5 mg dose on day 10. Because this serum level occurred while the mother was taking a lower morphine dose, the authors surmised that the infant likely had serum milk levels in what they considered a therapeutic range of over 20 mcg/L during the time the mother was taking higher morphine doses.[8]

### Effects in Breastfed Infants

In a term infant with unexplained apnea and bradycardia with cyanosis while hospitalized in the first week of life, the measured plasma morphine in the infant was 1.2 mcg/L. The measurement was taken 108 hours after the mother's last dose of morphine and no morphine was detected in her milk. The mother's dose was not reported.[13]

Breastfed newborns of mothers using intravenous PCA morphine for postcesarean analgesia were more alert and better oriented after postpartum day 3 than infants of mothers using intravenous PCA meperidine and nonbreastfed control infants. There was no difference in newborn respiratory rates. The authors stated that the mothers of nonbreastfed infants had greater parity than the breastfeeding mothers which, combined with a presumed lower desire to breastfeed, may have contributed to the lower behavioral and alertness scores in the nonbreastfed newborns.[7,14]

A study of pregnant women being treated for opiate dependency with slow-release oral morphine at a clinic in Vienna were followed as were their newborn infants. Compared to infants who were not breastfed (n = 91), breastfed infants (n = 21) had lower average measures of neonatal abstinence, lower dosage requirements of morphine (5.23 mg vs 8.75 mg), shorter durations of treatment for neonatal abstinence (10.2 vs 18.1 days) and shorter hospital stays (19.7 vs 31 days).[15]

A search was performed of the shared database of all U.S. poison control centers for the time period of 2001 to 2017 for calls regarding medications and breastfeeding. Of 2319 calls in which an infant was exposed to a substance via breastmilk, 7 were classified as resulting in a major adverse effect, and one of these involved morphine. A one-month-old infant was exposed to fentanyl, morphine, oxycodone, and unspecified benzodiazepines. The infant was admitted to the intensive care unit and described as being agitated and irritable and having tachycardia, confusion, drowsiness, lethargy, miosis, respiratory depression, acidosis, and hyperglycemia. The dosages, routes of administration, and extent of breastfeeding were not reported and the infant survived.[16]

An infant was born to a mother with opioid use disorder who was taking up to 2 grams of intravenous fentanyl daily. In the hospital she was transitioned to intravenous hydromorphone 120 mg three times daily, oral hydromorphone 32 mg every hour as needed, and methadone 70 mg daily by mouth. After 9 days of tapering the oral morphine dosage, the infant was given 72 mL of the mother’s expressed milk. On day 10, the infant received two doses of 0.1 mg of oral morphine and then breastfed for 30 minutes 3 hours after a maternal dose of 110 mg of intravenous hydromorphone. The infant was alert and active, feeding and sleeping well, and the infant’s morphine was discontinued. There were no clinically relevant episodes of apnea, bradycardia, desaturation, signs of respiratory depression, or excessive sedation. The infant continued to receive formula plus either breastfeeding or expressed milk with no clinically important adverse effects. The mother’s hydromorphone dose was tapered over 47 days while oral methadone and oral slow-release morphine were increased to 190 mg and 1200 mg daily, respectively, and she was discharged on day 58 postpartum. The extent of breastfeeding after hospital discharge was not reported. At 4 months of age, the infant scored above average on all developmental domains.[17]

In population study in the province of Ontario, Canada, 85,852 who filled an opioid prescription within seven days of discharge after delivery were matched to 538,815 did not. Compared with infants born to mothers who were not prescribed an opioid, those born to mothers prescribed an opioid were no more likely to be admitted to hospital in the 30 days after the index date. Infants born to mothers prescribed opioids after delivery were slightly more likely to be taken to the emergency department in the subsequent 30 days (hazard ratio 1.04). No infant deaths occurred. Nineteen percent of the mothers prescribed an opioid were prescribed morphine. Of note is that the median drug supply was for 3 days (IQR 2-4).[18]

A study compared pain control in women give, morphine sulfate by intravenous patient-controlled analgesia (PCA) following cesarean section or a single dose of intramuscular dinalbuphine sebecate 150 mg followed by PCA with morphine sulfate. All women were also given mefenamic acid 500 mg four times daily and propacetamol as needed. The dinalbuphine group used a lower amount of morphine by PCA, although the difference was not statistically significant, and a significantly lower amount of propacetamol. No instances of respiratory suppression, urinary retention, constipation, vomiting, or skin rash were observed after breastfeeding in either group.[19]

### Effects on Lactation and Breastmilk

Morphine can increase serum prolactin.[20] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[21]

A randomized, blinded study in 250 women receiving a cesarean section at term compared the effects on breastfeeding of postpartum intrathecal morphine 300 to 500 mcg to a control group who received a non-opiate for pain. Systemic morphine or meperidine could be given to control mothers for severe breakthrough pain. All mothers also received midazolam 2 mg after cord clamping and oxytocin. At 2 months of age, there was no difference in the breastfeeding rates between the two groups, although infant weight gain was about 5% lower in the spinal morphine group.[22]

A prospective study in an Australian hospital compared mothers who received epidural fentanyl analgesia, subcutaneous morphine or neither during labor and delivery. When controlled for labor induction, instrumental delivery and special care nursery admission, no difference was seen between the 3 groups in breastfeeding rates at discharge or at 6 weeks postpartum.[23]

A prospective cohort study of postcesarean pain control compared (1) morphine PCA and scheduled ibuprofen for the first 12 hours followed by continued scheduled ibuprofen with hydrocodone-acetaminophen as needed to a multimodal pain management regimen consisting of (2) acetaminophen 1000 mg orally every 8 hours, ketorolac 30 mg IV once initially, then 15 mg IV every 8 hours for 24 hours, then ibuprofen 600 mg orally every 8 hours for the remainder of the postoperative course with opioids given only as needed. Of women who planned to exclusively breastfeed on admission, fewer women used formula prior to discharge in the multimodal group compared to the traditional group (9% vs. 12%).[4]

A study of mother who delivered vaginally with epidural analgesia were randomized to receive either 2 mg of preservative-free morphine or saline via the epidural catheter within 1 hour of vaginal delivery. The morphine was more effective than placebo, but there was no difference in breastfeeding rates at 1 or 6 weeks postpartum.[24]

A multicenter, prospective cohort study in Hong Kong of 1277 women who gave birth found that women who received epidural analgesia with either fentanyl or morphine had no decreased frequency breastfeeding in the first hour compared to mothers who did not receive epidural analgesia. All epidural injections were combined with a local anesthetic, but the exact dosages were not given.[25]

A study compared pain control in women give, morphine sulfate by intravenous patient-controlled analgesia (PCA) following cesarean section or a single dose of intramuscular dinalbuphine sebecate 150 mg followed by PCA with morphine sulfate. All women were also given mefenamic acid 500 mg four times daily and propacetamol as needed. Within 4 days of the procedure, 67% of morphine-only and 72% of participants in the dinalbuphine sebecate group gave breastmilk, 17 (52%) participants in morphine-only and 20 (63%) in dinalbuphine group breastfed at least once during the assessment period, and 15% in the morphine-only and 9% in dinalbuphine group gave pumped breast milk via a baby bottle only. The time between cesarean section and feeding via a baby bottle or breastfeeding was shorter in the group who received dinalbuphine, 1 day vs 1.7 days.[19]

### Alternate Drugs to Consider

(Analgesia) Acetaminophen, Butorphanol, Celecoxib, Diclofenac, Flurbiprofen, Fentanyl, Hydromorphone, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Lamvu G, Feranec J, Blanton E. Perioperative pain management: An update for obstetrician-gynecologists. Am J Obstet Gynecol 2018;218:193–9. 28666699
2 Mitchell J, Jones W, Morris S, et al. Guidelines for anaesthesia and sedation for patients who are breastfeeding: Guidelines from the Association of Anaesthetists. Anaesthesia 2026;81:685–701. 41532178
3 Ito S. Opioids in breast milk: Pharmacokinetic principles and clinical implications. J Clin Pharmacol 2018;58 (Suppl 10):S151–S63. 30248201
4 Macias DA, Adhikari EH, Eddins M, et al. A comparison of acute pain management strategies after cesarean delivery. Am J Obstet Gynecol 2021;226:407.e1–.e7.
5 Feilberg VL, Rosenborg D, Broen Christensen, C, et al. Excretion of morphine in human breast milk. Acta Anaesthesiol Scand 1989;33:426–8. 2800981
6 Bernstein J, Patel N, Moszczynski Z, et al. Colostrum morphine concentrations following epidural administration. Anesth Analg 1989;68:S23. https://journals.lww.com/anesthesia-analgesia/toc/1989/02001
7 Wittels B, Scott DT, Sinatra RS. Exogenous opioids in human breast milk and acute neonatal neurobehavior: A preliminary study. Anesthesiology 1990;73:864–9. 2240676
8 Robieux I, Koren G, Vandenbergh H, et al. Morphine excretion in breast milk and resultant exposure of a nursing infant. J Toxicol Clin Toxicol 1990;28:365–70. 2231835
9 Zakowski MI, Ramanathan S, Turndorf H. A two-dose epidural morphine regimen in cesarean section patients: Pharmacokinetic profile. Acta Anaesthesiol Scand 1993;37:584–9. 8213024
10 Oberlander TF, Robeson P, Ward V, et al. Prenatal and breast milk morphine exposure following maternal intrathecal morphine treatment. J Hum Lact 2000;16:137–42. 11153344
11 Baka NE, Bayoumeu F, Boutroy MJ, et al. Colostrum morphine concentrations during postcesarean intravenous patient-controlled analgesia. Anesth Analg 2002;94:184–7. 11772825
12 Guo Q, Zheng KY, Chen FY, et al. Study on pharmacokinetics of morphine in the latex of lying-in women after PCA. Chin Pharm J (China) 2008;43:127–8.
13 Naumburg EG, Meny RG, Findlay J, et al. Codeine and morphine levels in breast milk and neonatal plasma. Pediatr Res 1987;21 (4, Pt 2):240A. doi:10.1203/00006450-198704010-00437
14 Wittels B, Glosten B, Faure EA, et al. Postcesarean analgesia with both epidural morphine and intravenous patient-controlled analgesia: Neurobehavioral outcomes among nursing neonates. Anesth Analg 1997;85:600–6. 9296416
15 Metz VE, Comer SD, Pribasnig A, et al. Observational study in an outpatient clinic specializing in treating opioid-dependent pregnant women: Neonatal abstinence syndrome in infants exposed to methadone-, buprenorphine- and slow-release oral morphine. Heroin Addict Relat Clin Probl 2015;17:5–15. https://www.heroinaddictionrelatedclinicalproblems.org/harcp-archives.php?year=2015
16 Beauchamp GA, Hendrickson RG, Horowitz BZ, et al. Exposures through breast milk: An analysis of exposure and information calls to U.S. poison centers, 2001-2017. Breastfeed Med 2019;14:508–12. 31211594
17 Patricelli CJ, Gouin IJ, Gordon S, et al. Breastfeeding on injectable opioid agonist therapy: A case report. J Addict Med 2022;7:222–6.
18 Zipursky JS, Gomes T, Everett K, et al. Maternal opioid treatment after delivery and risk of adverse infant outcomes: Population based cohort study. Bmj 2023;380:e074005. 36921977
19 Hou PH, Chung SM, Huang JY, et al. Efficacy and safety of extended-release dinalbuphine sebacate in a multimodal analgesic regimen following cesarean section: A prospective observational study. Taiwan J Obstet Gynecol 2026;65:539–45.
20 Tolis G, Dent R, Guyda H. Opiates, prolactin, and the dopamine receptor. J Clin Endocrinol Metab 1978;47:200–3. 263291
21 Lind JN, Perrine CG, Li R. Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact 2014;30:167–73. 24451212
22 Yousefshahi F, Davari-Tanha F, Najafi A, et al. Effects of intrathecal opioids use in cesarean section on breastfeeding and newborns' weight gaining. J Family Reprod Health 2016;10:176–83. 28546816
23 Mahomed K, Wild K, Brown C, et al. Does fentanyl epidural analgesia affect breastfeeding: A prospective cohort study. Aust N Z J Obstet Gynaecol 2019;59:819–24. 30957895
24 Katz D, Hyers B, Siddiqui S, et al. Impact of neuraxial preservative-free morphine in vaginal delivery on opiate consumption and recovery: A randomized control trial. Anesth Analg 2025;140:1063–70. 39028662
25 Fan HSL, Wong JYH, Fong DYT, et al. Association between intrapartum factors and the time to breastfeeding initiation. Breastfeed Med 2020;15:394–400. 32283038

## Substance Identification

### Substance Name

Morphine

### CAS Registry Number

57-27-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics